# Parathyroid Hormone

## Drug Levels and Effects

### Summary of Use during Lactation

Because parathyroid hormone is a large protein molecule, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] Evidence from one case indicates no harm to the breastfed infant with maternal recombinant human parathyroid hormone (1-84). Monitor breastfed infants for signs and symptoms of hypercalcemia or hypocalcemia. Serum calcium monitoring should be considered.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with hypoparathyroidism was taking recombinant human parathyroid hormone (1-84) and became pregnant. She stopped the drug at 5 weeks of gestation and the calcium dose was increased to 3500 mg daily and calcitriol 1 mcg daily in divided doses was started. At 12 weeks of pregnancy, her calcitriol dose was increased to 1.5 mcg daily and it remained at this dose for the remainder of pregnancy. She restarted parathyroid hormone postpartum at a dose of 75 mcg daily, discontinued calcitriol and her calcium dose was reduced to 500 mg daily. At 3 months postpartum, her parathyroid hormone dose was reduced to 50 mcg daily. She breastfed (extent not stated) her infant for 6 months. The infant’s calcium levels were in the high normal range for her first 8 weeks of breastfeeding, but that could have been caused by the mother’s intake of calcitriol during pregnancy. At 4 years and 5 months of age the child was healthy and meeting developmental milestones.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488
3 Liao EP, Cusano NE. Use of rhPTH(1-84) for hypoparathyroidism during early pregnancy and lactation. Endocrinol Diabetes Metab Case Rep 2023;2023:22-0401.37335755

## Substance Identification

### Substance Name

Parathyroid Hormone

### Drug Class

Breast Feeding

Lactation

Milk, Human

Parathyroid Hormone

Calcium-Regulating Hormones and Agents

Bone Density Conservation Agents